# Tedizolid

CASRN: 856866-72-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tedizolid during breastfeeding. Tedizolid is 70 to 90% bound in maternal plasma, so large amounts are not expected to appear in breastmilk. If tedizolid is required by the mother, it is not a reason to discontinue breastfeeding, but because there is no published experience with tedizolid during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Daptomycin, Doxycycline, Linezolid, Trimethoprim-Sulfamethoxazole, Vancomycin

## Substance Identification

### Substance Name

Tedizolid

### CAS Registry Number

856866-72-3

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents